# Upadacitinib

CASRN: 1310726-60-3

## Drug Levels and Effects

### Summary of Use during Lactation

The amounts of upadacitinib in breastmilk are low, but no information is available on the clinical use of upadacitinib during breastfeeding. Until more data become available, upadacitinib should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Expert opinion considers breastfeeding to be unadvisable during tofacitinib use at this time.[1-4] The manufacturer recommends that breastfeeding be withheld for 6 days after the last dose.

### Drug Levels

Maternal Levels. Forty breastmilk samples were obtained from 4 women taking either 30 mg (n = 2) or 45 mg (n = 2) daily of upadacitinib. Three of the women had a sufficient number of samples over a 24-hour period to calculate the RID on that day, with 2 of them having a sufficient number on two separate days. The daily RID values were 6.5% and 9.6% in patient 1, 5.7% in patient 2, and 3.8% and 6.1% in patient 3. Individual single-point RIDs of patient 4 fell within the range of the other patients. When all 40 single-point RID values from the 4 women were considered, the median RID was 2.66% (IQR 0.75% to 10.58%). The daily infant dosages were calculated to range from 3.8 to 59.7 mcg/kg. It is unclear why there was such a large range of milk levels, RID values, and infant dosages.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Rheumatoid Arthritis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Tocilizumab

### References

1 Selinger C, Laube R, Limdi JK, et al. Appropriateness of small molecule agents for patients with IBD of childbearing age - a RAND/UCLA appropriateness panel. Therap Adv Gastroenterol 2024;17:17562848241299737.39539488
2 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910–26.40287311
3 Mahadevan U, Seow CH, Barnes EL, et al. Global consensus statement on the management of pregnancy in inflammatory bowel disease. Clin Gastroenterol Hepatol 2025;23 (11S):S1–S60.40874901
4 Duricova D, Sonnenberg E, Augustijns P, et al. Upadacitinib in mother with inflammatory bowel disease: Placental transfer and breast milk excretion. Clin Gastroenterol Hepatol 2026;24:1179–81.e1.40571170

## Substance Identification

### Substance Name

Upadacitinib

### CAS Registry Number

1310726-60-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors

Janus Kinase Inhibitors

JAK Inhibitors